# Idarubicin

CASRN: 58957-92-9

## Drug Levels and Effects

### Summary of Use during Lactation

Most sources consider breastfeeding to be contraindicated during maternal antineoplastic drug therapy, especially anthracyclines such as idarubicin.[1] The manufacturer recommends that breastfeeding be discontinued during therapy with idarubicin and for 14 days after the last dose, which is consistent with the 72-hour half-life of the active metabolite idarubicinol.

Chemotherapy may adversely affect the normal microbiome and chemical makeup of breastmilk.[2] Women who receive chemotherapy during pregnancy are more likely to have difficulty nursing their infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Pistilli B, Bellettini G, Giovannetti E, et al. Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding? Cancer Treat Rev 2013;39:207-11.23199900
2 Urbaniak C, McMillan A, Angelini M, et al. Effect of chemotherapy on the microbiota and metabolome of human milk, a case report. Microbiome 2014;2:24.25061513

## Substance Identification

### Substance Name

Idarubicin

### CAS Registry Number

58957-92-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Anthracyclines

Antibiotics, Antineoplastic

Topoisomerase II Inhibitors